# Metoclopramide

CASRN: 364-62-5

## Drug Levels and Effects

### Summary of Use during Lactation

Metoclopramide is excreted in variable amounts in breastmilk. After oral and intranasal administration, most infants would receive less than 10% of the maternal weight-adjusted dosage, but some receive doses that achieve pharmacologically active serum levels, elevated serum prolactin and possible gastrointestinal side effects. Although most studies have found no adverse effects in breastfed infants during maternal metoclopramide use, many did not adequately observe for side effects.

Metoclopramide increases serum prolactin and has been used as a galactogogue.[1,2] In well-designed studies that evaluated the effectiveness of metoclopramide as a galactogogue in women who continue to have difficulty producing milk after nursing techniques have been optimized, it was of no additional benefit. Prophylactic use in the mothers of preterm infants has also shown little or no benefit. A meta-analysis of 5 placebo-controlled studies concluded that 2 weeks of metoclopramide caused no increase of serum prolactin over placebo, but 3 weeks of treatment did.[3] A more recent meta-analysis concluded that metoclopramide was of no benefit as a galactogogue in the mothers of preterm infants.[4] A third meta-analysis of 8 trials involving 342 lactating women with a preterm or full-term infant found that metoclopramide increased serum prolactin, but did not increase milk supply.[5] The lack of efficacy of metoclopramide as a galactogogue was confirmed in the most recent and largest meta-analysis.[6] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[7,8]

Metoclopramide has no officially established dosage for increasing milk supply. Most studies have used metoclopramide in a dosage of 10 mg 2 or 3 times daily for 7 to 14 days. Some studies used a tapering dosage for the last days few of the regimen to avoid an abrupt drop in milk supply after drug discontinuation. No published literature supports the efficacy or safety of higher dosages, longer treatment periods or repeated courses of therapy.

Postpartum mothers are at a relatively high risk for postpartum depression and metoclopramide can cause depression as a side effect. Therefore, metoclopramide should probably be avoided in women with a history of major depression and not used for prolonged periods in any mothers during this time of high susceptibility.[9,10] Long-term uses of metoclopramide also increases the risk of tardive dyskinesia.[11] Other reported side effects in nursing mothers include tiredness, nausea, headache, diarrhea, dry mouth, breast discomfort, vertigo, restless legs, intestinal gas, hair loss, irritability and anxiety.[10,12-14] In a survey of nursing mothers in the United States, 32 had used metoclopramide as a galactogogue and all reported having experienced an adverse reaction from the drug.[15] A larger survey of women taking metoclopramide for lactation enhancement found that 4.8% of women had either palpitations or racing heart rate, 12% reported depression, and 1 to 7% reported other central nervous system side effects ranging from dizziness and headache to involuntary grimacing and tremors. Diarrhea, irritability and fatigue were also relatively common.[16]

### Drug Levels

Maternal Levels. Ten mothers who were 7 to 10 days postpartum were given a single oral dose of metoclopramide 10 mg. Two hours after the dose, the average milk level was 126 mcg/L. The authors estimated that a fully breastfed infant would receive a maximum daily dosage of 45 mcg/kg.[17]

Five mothers took metoclopramide 10 mg orally 3 times daily beginning on day 3 to 9 postpartum because of an insufficient milk supply. Metoclopramide in milk samples taken 1 to 2 hours after a 10 mg dose on days 4 and/or 14 ranged from 52 to 157 mcg/L. The authors estimated that these infants would receive maximum metoclopramide dosages of 6 to 24 mcg/kg daily. The same paper reported on 18 women who received metoclopramide 10 mg orally 3 times daily beginning in week 8 to 12 postpartum. Milk levels measured once on the morning of day 9 to 11 of therapy averaged 48 mcg/L (range 21 to 125 mcg/L). The authors estimated that these infants would receive maximum metoclopramide dosages averaging 5.2 mcg/kg (range 0.8 to 13.2 mcg/kg) daily.[18] This latter group of infants would receive about 1% of the maternal weight-adjusted dosage.

Seventeen women who were part of a study of metoclopramide for enhancing lactation in mothers of premature infants had complete 24-hour milk samples measured for metoclopramide. The dosage was 10 mg orally 3 times daily and milk samples were collected between day 6 and 14 of therapy. Three of the mothers had no measurable metoclopramide in milk. The other 14 mothers had metoclopramide milk levels averaging 45 mcg/L. The authors calculated that a fully breastfed infant would receive 11 mcg/kg daily.[19,20] This corresponds to about 2% of the maternal weight-adjusted dosage and 7 to 11% of a dose for preterm infants.[21]

Infant Levels. Five breastfed infants were studied whose mothers were taking metoclopramide 10 mg orally 3 times daily beginning on the day 3 to 9 postpartum because of an insufficient milk supply. Serum metoclopramide levels were undetectable (<2 mcg/L) in 4 infants; the fifth had serum levels of 20.9 and 18.6 mcg/L on days 4 and 14 postpartum, respectively. These levels averaged 8% of the infant's mother's metoclopramide serum levels which were very high.[18] A study of neonates who each received a single oral dose of 100 to 150 mcg/kg found peak serum levels averaging 17.7 mcg/L, which is similar to the levels achieved in the breastfed infant with metoclopramide detectable in serum.[21]

A 21-week-old breast-fed boy presented with an unexplained acute extrapyramidal syndrome that occurred 48 hours after his mother used a metoclopramide 10 mg rectal suppository. At 60 hours after the reaction, metoclopramide was found in the infant’s plasma at a concentration of 8 mcg/L. A hair sample taken 1.5 months after the reaction found metoclopramide in a concentration of 1058 pg/mg.[22]

### Effects in Breastfed Infants

In an early report, 5 infants were nursed during 7 to 10 days of maternal metoclopramide therapy at a dosage of 10 mg orally 3 times daily. No adverse effects were noted.[23]

In a placebo-controlled study of the effect of metoclopramide on milk production in 37 women, an infant whose mother was taking oral metoclopramide 15 mg 3 times daily reportedly had intestinal discomfort. No infants whose mothers were taking a dosage of 5 or 10 mg 3 times daily or placebo had any adverse effects. Metoclopramide was possibly the cause of the adverse reaction.[12]

Seventeen mothers with poor lactation were treated with oral metoclopramide 10 mg 3 times daily for 3 weeks. One mother reported that she and her infant had increased intestinal gas formation during treatment. Metoclopramide was possibly the cause of the adverse reaction.[13]

Thirty-two mothers with complete or partial lactation failure were given oral metoclopramide 10 mg 3 times daily for 10 days and advised to nurse every 3 hours. None of the mothers reported adverse effects in their infants.[24]

Twenty-three premature infants whose mothers were having difficulty maintaining milk production had steady weight gain and no adverse effects related to feeding tolerance or stool frequency during maternal metoclopramide therapy. The mothers were taking oral metoclopramide 10 mg 3 times daily for 7 days, with a tapering dosage for 2 more days, beginning at an average of 32 days postpartum.[25]

Thirteen women with insufficient milk production who were 4 to 20 weeks postpartum were randomized to receive metoclopramide or placebo 10 mg orally 3 times daily. The average plasma prolactin levels before therapy and after 3 weeks of maternal therapy were no different in the infants of women who received metoclopramide or placebo.[26]

Eleven breastfed infants whose mothers were given oral metoclopramide 10 mg 3 times daily for 5 days beginning on day 1 postpartum were compared to the infants of 11 matched mothers who received no metoclopramide. No difference in average serum prolactin was found between the groups, indicating little transfer of the drug to the infants via breastmilk.[27]

Five breastfed infants were studied whose mothers were taking metoclopramide 10 mg orally 3 times daily beginning on the day 3 to 9 postpartum because of an insufficient milk supply. Before therapy, their plasma prolactin levels were similar to their mothers'. On day 4 of maternal therapy, 3 of the infants had plasma prolactin levels higher than the highest levels of control infants of the same age, and on day 14, one infant had a plasma prolactin level higher than the highest levels of control infants of the same age. Plasma levels in 3 other infants were in the normal range during therapy.[18]

A 21-week-old breast-fed boy presented with an unexplained acute extrapyramidal syndrome that occurred 48 hours after his mother used a metoclopramide 10 mg rectal suppository. Metoclopramide was found in the infant’s blood and a hair sample. The adverse reaction was probably caused by metoclopramide in milk.[28]

### Effects on Lactation and Breastmilk

Metoclopramide increases serum prolactin in lactating and nonlactating women.[3,29,30] This effect is thought to be caused by the drug's antidopaminergic effect. Galactorrhea has been reported after long-term use of metoclopramide for nausea associated with migraine. The patient was taking 10 to 40 mg 1 to 4 times weekly for about 4 months.[31] Other cases of galactorrhea have been reported in nonpregnant, nonlactating women after 2 to 5 days of treatment with normal or slightly low serum prolactin levels.[32,33]

Numerous papers have reported studies that used metoclopramide to increase milk production. All studies were small with 40 or fewer patients. Most of the studies have designs that would not be considered valid using today's standards of evidence-based medicine. Many of the studies had no placebo control;[13,18,24,25,27,34-36] only 7 studies employed randomization;[12,17,20,26,37-39] and only 2 studies were clearly and adequately blinded.[20,37] The studies that meet or come close to meeting current evidence-based medicine standards are described in more detail below.

In one early double-blind study, 20 women who had undergone delivery by emergency or elective cesarean section were randomized to take oral metoclopramide 10 mg 3 times daily (n=10) or placebo for 7 days (n=10) beginning on the first day after cesarean section.[17] All mothers expressed a desire to breastfeed their infants for at least 3 months and received daily visits by an investigator to discuss breastfeeding problems and were given advice and encouragement to breastfeed. The mothers in the 2 groups were closely matched except that 3 preterm infants in the metoclopramide group were separated from their mothers in the intensive care unit and were nursed there initially and fed expressed milk until discharge. At 10 days postpartum, there were no differences in the number of infants being breastfed in each group; at 6 weeks postpartum, 9 women were breastfeeding in the metoclopramide group and 8 in the placebo group; and 3 months postpartum 4 were breastfeeding in each group. Although this was a small study, it was well designed and executed. It provided preliminary evidence of the benefit of patient counseling and encouragement on breastfeeding success.

Thirteen primiparous nursing mothers without breastfeeding difficulties and normal infants were given either oral metoclopramide 10 mg 3 times daily (n=7) or placebo (n=6) for 8 days beginning on the first day postpartum in a randomized, double-blind study.[37] No attempt was made to improve nursing technique, but mothers nursed on a 3-hour schedule beginning at 6:30 am on the day following delivery. No mention was made of the type of feeding, or the number of feedings that the infants received between birth and the initiation of breastfeeding or any differences in the two groups of infants in this regard. All women completed the trial. No differences were found in serum prolactin of treated and control women throughout 28 days of observation. Milk intake as measured by infant weight change before and after the second daily feeding on days 3 through 8 was greater by an average of 24.3 mL (51.1 mL vs 75.4 mL) in the infants of treated mothers; however, statistically significant differences in milk production did not occur until day 5 postpartum. This paper has several serious flaws related to its analysis. One is that the paper does not state the number of feedings per day, so the fraction of the infant's daily feedings that this one feeding represented is unknown. The study also failed to report serial infant weight gain during the study period. These serious problems invalidate the study results.

Fifty mothers who had complete or partial lactation failure received extensive instruction on how to increase their milk supply.[38] Their infants were hospitalized for various illnesses and ranged from 29 to 100 day of age. Maternal lactation history was comparable in the two groups. Mothers were randomized to either receive or not receive metoclopramide 10 mg 3 times daily for 10 days. Although no specific metoclopramide placebo was given to control mothers, all mothers received multivitamins, iron, and folic acid daily which the authors used to obscure to the mother whether she was receiving an active drug or not. No statistically significant differences were found between the groups in the time to initiation of milk secretion, to partial restoration of breastfeeding, or to complete breastfeeding or in the weight gain of the infants during the study period of 96 days. The authors concluded that successful relactation can be accomplished without galactogogues such as metoclopramide. This study lacked a true placebo control; however, it employed excellent breastfeeding instruction and infant evaluation techniques and had the best overall design of any of the studies on mothers who had older infants and well documented insufficient milk supplies at the start of the study.

In a well-controlled and analyzed, randomized, double-blinded study of the mothers of premature (23 to 34 weeks) infants, mothers received either metoclopramide 10 mg 3 times daily (n=31) or placebo (n=29) for 10 days beginning within 96 hours of delivery.[20] The groups were well matched and all mothers received standardized instructions from a lactation consultant and provided access to breastfeeding support. No selection was made for mothers who were having difficulties producing milk. Six subjects each in the drug and placebo groups dropped out for a relatively high dropout rate of 17.4%. Although by far the best designed and executed study to date on any galactogogue, the study enrolled all mothers of preterm infants without any evaluation of their ability to produce milk. This population may in general need lactation support, but the possible inclusion of women in both the active drug and placebo groups who would have had little difficulty in milk production may have minimized differences between the groups.

A study of 20 primiparous mothers whose infant were not gaining weight adequately compared metoclopramide (n = 10) to placebo (n = 10) for increasing milk supply. All mothers passed a brief training course on improving breastfeeding technique and the benefits of breastfeeding before entering the study. All infants gained weight over the next 2 weeks. The increase in weight in the metoclopramide group was not different from the placebo group.[39]

Two women whose infants were born via a surrogate pregnancy. One woman stopped metoclopramide 1 week prior to the expected delivery date and the other continued metoclopramide postpartum. They also underwent postpartum nipple stimulation with an electric breast pump. Lactation was established and they were each able to partially breastfeed their infants for 3 months.[40,41]

A double-blind randomized study compared the effect on milk production of metoclopramide 10 mg to placebo 3 times daily for 10 days in the mothers of preterm infants born at 28 to 34 weeks of gestation. At the beginning of investigation, all participating women were taught a standard breastfeeding method. Mothers used a breast pump for 10 to 15 minutes every 2 hours and the volume of milk was measured and recorded at each pumping for 10 days. No difference in daily milk volumes between the two groups occurred until day 7 postpartum, when treated mothers pumped an average of 373 mL compared with 352 mL in the mothers receiving placebo. This difference of about 20 mL per day persisted until the end of the study on day 10 when the treated group pumped 446 mL and the placebo group pumped 422 mL.[42] The clinical importance of the extra 20 mL of milk per day is questionable.

A randomized, double-blind study of 26 mothers who delivered at 34 weeks of gestation or less, compared metoclopramide 10 mg 3 times daily to placebo. The drug or placebo was taken for 8 days beginning within 36 hours of delivery. All women were provided breast pumps and support from a lactation consultant. The total volume of milk pumped per day was recorded by the women, 19 of whom completed the entire protocol. Although milk production increased over the 8-day period, metoclopramide was no better than placebo and the standard care provided. No difference in reported side effects was found.[43]

Mothers who were expressing milk for their infants in a neonatal intensive care unit (mean gestational age 28 weeks) were given instructions on methods for increasing milk supply. If they were producing less than 160 mL of milk per kg of infant weight daily after several days, mothers were randomized to receive either domperidone or metoclopramide 10 mg by mouth 3 times daily for 10 days in a double-blinded fashion. Thirty-one mothers who received domperidone and 34 who received metoclopramide provided data on daily milk volumes during the 10 days. Milk volumes increased over the 10-day period by 96% with domperidone and 94% with metoclopramide, which was not statistically different between the groups. Some mothers continued to measure milk output after the end of the medication period. Results were similar between the 2 groups. Side effects in the domperidone group (3 women) included headache, diarrhea, mood swings and dizziness. Side effects in the metoclopramide group (7 women) included headache (3 women), diarrhea, mood swings, changed appetite, dry mouth and discomfort in the breasts. Of 29 women who took metoclopramide after the trial ended, 8 reported side effects including diarrhea, mood swings, depression (2 women), itchy skin, tiredness, restless legs and less effective milk stimulation.[10] The lack of a placebo group and the projection of milk volumes to impute missing data from some mothers detract from the findings of this study.

A triple-blind, randomized, controlled study in Iran compared maternal serum prolactin and milk volume and infant bilirubin in mothers who received placebo (n = 51) or metoclopramide 10 mg (n = 50) three times daily for 5 days beginning 2 to 10 hours postpartum. In the per-protocol analysis, serum prolactin increased on day 6 postpartum from 271.5 mcg/L to 287.5 mcg/L in the domperidone group, but decreased from 273.3 mcg/L to 250.7 mcg/L in the placebo group, which was a statistically significant difference. There were no statistically significant differences in the volume of manually expressed milk 2 hours after a feeding in the morning or infant serum bilirubin between the groups on day 6 postpartum.[2]

In a randomized study in Singapore reported as a preprint, 105 mothers with preterm and term infants were randomized to placebo (n = 49) or metoclopramide (n = 56) 30 mg daily (exact regimen not stated) starting within 12 hours postpartum. Metoclopramide achieved 25% augmentation in lactogenesis II onset, but the difference was not statistically significant, with greater expressed human milk volumes in mothers of preterm infants. Daily expressed human milk volumes were higher among preterm mothers on metoclopramide compared to term placebo mothers who served as controls. The difference was significant on day 2 (19.9 mL vs 2.4 mL) and day 3 (32.6 mL vs 8.8 mL). Total expressed human milk volumes had increased by 8.2 fold by the end of week one. Most mothers reported first initiation of lactogenesis II by day 6, with 95-100% of term mothers confirmed by day 5, with no significant difference among groups.[44]

In a survey of nursing mothers in Australia, 21 mothers were taking metoclopramide as a galactogogue. On average, mothers rated metoclopramide as being between “slightly effective” and “moderately effective” on a Likert scale. Twenty-nine percent of mothers taking metoclopramide reported experiencing adverse reactions, most commonly weight gain, nausea, headache, dry mouth, fatigue, irritability, depression and involuntary movements.[14]

A 50-year-old transgender woman wished to breastfeed her grandchild was taking baseline treatment with estradiol 0.3 mg transdermal patch every 72 hours and micronized progesterone 200 mg oral once daily. To initiate lactation, her estradiol dose was increased to a 0.4 mg transdermal patch every 72 hours and nipple stimulation was initiated. Later the patient’s progesterone was increased to 300 mg daily and metoclopramide oral 10 mg three times daily was initiated. She lactated for a total of two weeks and nursed the four-month-old infant on multiple occasions. Her peak milk production was 30 mL from her larger right breast, and 8 mL from her smaller left breast.[45]

### References

1 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317–8.22224508
2 Tabrizi SO, Mirghafourvand M, Dost AJ, et al. Effect of metoclopramide administration to mothers on neonatal bilirubin and maternal prolactin: A randomized, controlled, clinical trial. World J Pediatr 2019;15:135–42.30519818
3 Tabrizi SO, Mirghafourvand M, Seyedi R. The effect of metoclopramide on prolactin levels in breastfeeding mothers: A systematic review and meta-analysis. International Journal of Pediatrics (Mashhad) 2017;5:5827–38. doi:10.22038/ijp.2017.24678.2083
4 Shen Q, Khan KS, Du MC, et al. Efficacy and safety of domperidone and metoclopramide in breastfeeding: A systematic review and meta-analysis. Breastfeed Med 2021;16:516–29.33769844
5 Hussain NHN, Noor NM, Ismail SB, et al. Metoclopramide for milk production in lactating women: A systematic review and meta-analysis. Korean J Fam Med 2021;42:453–63.34871486
6 Si S, Zhao G, Song G, et al. Efficacy and safety of domperidone and metoclopramide on human milk production in postpartum mothers: A bayesian network meta-analysis of randomized controlled trials. BMC Pregnancy Childbirth 2024;24:819.39695450
7 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
8 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
9 Balikci A, Balibey H. Postpartum depression due to use of metoclopramide: A case report. Anatolian J Clin Invest 2012;6:258–60.
10 Ingram J, Taylor H, Churchill C, et al. Metoclopramide or domperidone for increasing maternal breast milk output: A randomised controlled trial. Arch Dis Child Fetal Neonatal Ed 2012;97:F241–5.22147287
11 Anon. FDA requires boxed warning and risk mitigation strategy for metoclopramide-containing drugs. FDA News February 26, 2009
12 Kauppila A, Kivinen S, Ylikorkala O. A dose response relation between improved lactation and metoclopramide. Lancet 1981;1:1175–7.6112526
13 Kauppila A, Kivinen S, Ylikorkala O. Metoclopramide increases prolactin release and milk secretion in puerperium without stimulating the secretion of thyrotropin and thyroid hormones. J Clin Endocrinol Metab 1981;52:436–9.6780593
14 McBride GM, Stevenson R, Zizzo G, et al. Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558
15 Bazzano A, Thibeau S, Brandt A, et al. Mothers' experiences with using galactagogues for lactation: An exploratory cross-sectional study. Ochsner J 2016;16:388.
16 Hale TW, Kendall-Tackett K, Cong Z. Domperidone versus metoclopramide: Self-reported side effects in a large sample of breastfeeding mothers who used these medications to increase milk production. Clin Lact (Amarillo) 2018;9:10–7. doi:10.1891/2158-0782.9.1.10
17 Lewis PJ, Devenish C, Kahn C. Controlled trial of metoclopramide in the initiation of breast feeding. Br J Clin Pharmacol 1980;9:217–9.6986894
18 Kauppila A, Arvela P, Koivisto M, et al. Metoclopramide and breast feeding: Transfer into milk and the newborn. Eur J Clin Pharmacol 1983;25:819–23.6662181
19 Hansen W, Hunter S, McAndrew S, et al. Metoclopramide concentration in breast milk of women delivering between 23-34 weeks gestation. Am J Obstet Gynecol 2001;185 (6 Suppl):S116. doi:10.1016/S0002-9378(01)80162-9
20 Hansen WF, McAndrew S, Harris K, et al. Metoclopramide effect on breastfeeding the preterm infant: A randomized trial. Obstet Gynecol 2005;105:383–9.15684169
21 Kearns GL, van den Anker JN, Reed MD, et al. Pharmacokinetics of metoclopramide in neonates. J Clin Pharmacol 1998;38:122–8.9549642
22 Bellouard M, Abe E, Etting I, et al. Metoclopramide intoxication through breast milk: Relevance of blood and hair analyses. Indian J Pediatr 2023;90:314.36694076
23 Sousa PLR. Metoclopramide and breast-feeding. Br Med J 1975;1:512.1173219
24 Gupta AP, Gupta PK. Metoclopramide as a lactogogue. Clin Pediatr (Phila) 1985;24:269–72.3987166
25 Ehrenkranz RA, Ackerman BA. Metoclopramide effect on faltering milk production by mothers of premature infants. Pediatrics 1986;78:614–20.3763270
26 Kauppila A, Anunti P, Kivinen S, et al. Metoclopramide and breast feeding: Efficacy and anterior pituitary responses of the mother and the child. Eur J Obstet Gynecol Reprod Biol 1985;19:19–22.3884406
27 Ertl T, Sulyok E, Ezer E, et al. The influence of metoclopramide on the composition of human breast milk. Acta Paediatr Hung 1991;31:415–22.1790024
28 Bellouard M, Abe E, Etting I, et al. Metoclopramide intoxication through breast milk: Relevance of blood and hair analyses. Indian J Pediatr 2023 36694076
29 Andersen AN, Tabor A. Prl, TSH, GH and LH responses to metoclopramide and breast-feeding in normal and hyperprolactinaemic women. Acta Endocrinol (Copenh) 1982;100:177–83.7202316
30 Bohnet HG, Kato K. Prolactin secretion during pregnancy and puerperium: Response to metoclopramide and interactions with placental hormones. Obstet Gynecol 1985;65:789–92.3839061
31 Finnis WA, Bird CE, Wilson DL. Metoclopramide hydrochloride and galactorrhea. Can Med Assoc J 1976;115:845.1033026
32 Menon P, Thunga G, Nambiar S, et al. Atypical presentation of metoclopramide-induced galactorrhea. J Pharm Pract Res 2015;45:437–9. doi:10.1002/jppr.1123
33 Baía AT, Santos Alves R, Fonseca CF, et al. A curious case of galactorrhea in the context of gastroenteritis: A case report. Cureus 2026;18:e100679.41635342
34 Nemba K. Induced lactation: A study of 37 non-puerperal mothers. J Trop Pediatr 1994;40:240–2.7932939
35 Tolino A, Tedeschi A, Farace R, et al. The relationship between metoclopramide and milk secretion in puerperium. Clin Exp Obstet Gynecol 1981;8:93–5.6804132
36 Toppare MF, Laleli Y, Senses DA, et al. Metoclopramide for breast milk production. Nutr Res 1994;14:1019–29. doi:10.1016/S0271-5317(05)80256-8
37 de Gezelle H, Ooghe W, Thiery M, et al. Metoclopramide and breast milk. Eur J Obstet Gynecol Reprod Biol 1983;15:31–6.6350073
38 Seema, Patwari AK, Satyanarayana L. Relactation: An effective intervention to promote exclusive breastfeeding. J Trop Pediatr 1997;43:213–6.9283123
39 Sakha K, Behbahan AG. Training for perfect breastfeeding or metoclopramide: Which one can promote lactation in nursing mothers? Breastfeed Med 2008;3:120–3.18564001
40 Biervliet FP, Maguiness SD, Hay DM, et al. Induction of lactation in the intended mother of a surrogate pregnancy. Hum Reprod 2001;16:581–3.11228232
41 Shiva M, Frotan M, Arabipoor A, et al. A successful induction of lactation in surrogate pregnancy with metoclopramide and review of lactation induction. Int J Fertil Steril 2010;3:191–4.
42 Dastgerdi E, Shirazi M, Mohammadzadeh A, et al. Effect of metoclopramide on increased milk production in mothers of preterm infants. Iran J Obstet Gynecol Infertil 2011;14:32–6.
43 Fife S, Gill P, Hopkins M, et al. Metoclopramide to augment lactation, does it work? A randomized trial. J Matern Fetal Neonatal Med 2011;24:1317–20.21410420
44 Fok D, Chan YH, Ho J, et al. Oral metoclopramide boosts lactogenesis II in mothers with preterm infants: a randomized placebo-controlled trial. Preprint 2020 doi:10.21203/rs.3.rs-16243/v1
45 Trahair ED, Kokosa S, Weinhold A, et al. Novel lactation induction protocol for a transgender woman wishing to breastfeed: A case report. Breastfeed Med 2024;19:301–5.38535753

## Substance Identification

### Substance Name

Metoclopramide

### CAS Registry Number

364-62-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Dopamine Antagonists

Galactogogues

Gastrointestinal Agents